# Fedratinib

CASRN: 936091-26-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of fedratinib during breastfeeding. Most sources recommend that mothers not breastfeed while taking fedratinib. An alternate drug is preferred, especially while nursing a newborn or preterm infant. The manufacturer recommends that breastfeeding be withheld at least 1 month after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Tocilizumab

## Substance Identification

### Substance Name

Fedratinib

### CAS Registry Number

936091-26-8

### Drug Class

Breast Feeding

Lactation

Enzyme Inhibitors

Protein Kinase Inhibitors

Tyrosine Kinase Inhibitors

Signal Transduction Inhibitors

Janus Kinase Inhibitors

JAK Inhibitors